# Contraceptives, Oral, Combined

## Drug Levels and Effects

### Summary of Use during Lactation

Based on the available evidence, expert opinion in the United States holds that postpartum women who are breastfeeding should not use combined hormonal contraceptives during the first 3 weeks after delivery because of concerns about increased risk for venous thromboembolism and generally should not use combined hormonal contraceptives during the fourth week postpartum because of concerns about potential effects on breastfeeding performance. Postpartum breastfeeding women with other risk factors for venous thromboembolism generally should not use combined hormonal contraceptives until 6 weeks after delivery.[1] World Health Organization guidelines are more restrictive, stating that combined oral contraceptives should not be used in nursing mothers before 42 days postpartum and the disadvantages of using the method generally outweigh the advantages between 6 weeks and 6 months postpartum.[2] A decrease in milk supply can happen over the first few days of estrogen exposure.[3] The concentration of ethinyl estradiol in milk is negligible with dosses of 35 mcg or less daily.

The weight of current evidence seems to indicate that combination oral contraceptives probably do not affect the composition of milk substantially in healthy, well-nourished mothers and do not adversely affect long-term infant growth and development. Combined oral contraceptives might transiently affect growth negatively during the first month after introduction. The magnitude of the effect on lactation likely depends on the dose and the time of introduction postpartum. A treatment scheme has been reported for mothers with hypergalactia that uses low-dose combined oral contraceptives to decrease milk supply.[4] Ethinyl estradiol in doses greater than 30 mcg daily can suppress lactation and lead to more supplementation and possibly earlier discontinuation of breastfeeding than nonhormonal or progestin-only contraception. Cases of decreased milk supply with contraceptives containing 30 mcg of ethinyl estradiol have been reported. Additionally, introduction of an estrogen before 3 weeks postpartum may increase the risk of thromboembolism in postpartum women. Rare cases of reversible breast enlargement in breastfed infants have been reported, mostly with estrogen doses higher than are currently used.

### Drug Levels

Combination contraceptives contain an estrogen and a progestin. Ethinyl estradiol is the most commonly used estrogen. Mestranol is an ethinyl estradiol pro-drug; 80 mcg of mestranol is equivalent to 50 mcg of ethinyl estradiol. The progestins are primarily 19-nor testosterone derivatives such as levonorgestrel, norgestrel, norethindrone and norethynodrel. They have varying degrees of androgenic activity.

Maternal Levels. Studies that measured ethinyl estradiol in breastmilk are reported here. Studies that reported progestin levels in milk (e.g., levonorgestrel, norethindrone) can be found in the records of those drugs.

Four women who were fully nursing their infants were given a contraceptive containing ethinyl estradiol 50 mcg and megestrol acetate 4 mg beginning at 2 months postpartum. Another 4 women who were 6 to 18 months postpartum were given a single dose of 500 mcg of ethinyl estradiol. After 10 days of therapy, ethinyl estradiol was undetectable (<50 ng/L) in the milk of women who received the 50 mcg dose at several times after the dose. In those who receive 500 mcg, peak milk levels usually were found in the 3-hour sample although the peak was found in the 7-hour sample in one. Peak milk levels ranged from about 170 to 300 ng/L; levels dropped rapidly and were usually undetectable by 23 hours after the dose. Based on the higher dose, the authors estimated that a fully breastfed infant whose mother was taking 50 mcg of ethinyl estradiol daily would receive a dose of about 10 ng daily.[5]

Milk was collected and pooled from 2 groups of women who were taking ethinyl estradiol 100 mcg 3 times daily either immediately postpartum or after 1 to 6 months postpartum. Milk samples were collected 2 hours after the dose. Pooled milk was bioassayed for estrogenic activity and compared with the milk from lactating mothers taking no exogenous estrogens whose milk was collected at various times postpartum. No estrogenic activity was detected (<10 ng/80 mL of pooled milk [<0.125 mcg/L]) from women taking ethinyl estradiol above background estrogenic activity found in control colostrum.[6]

A study measured ethinyl estradiol in the milk of 14 breastfeeding women: 6 using combined oral contraceptives (15, 20, or 30 mcg daily of ethinyl estradiol), 7 using a vaginal ring

(15 mcg daily of ethinyl estradiol), and 1 using a transdermal patch (35 mcg daily of ethinyl estradiol). A control group of 8 breastfeeding women not using hormonal contraceptives was also included. Ethinyl estradiol was undetectable (<3.5 mcg/L) in all of the women.[7]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Bilateral breast enlargement was reported in a 3-week-old male breastfed infant whose mother began taking an oral contraceptive containing norethynodrel 2.5 mg and mestranol 100 mcg on day 3 postpartum. On the second cycle, she began taking norethynodrel 5 mg and mestranol 75 mcg in error and the breast enlargement became more pronounced. After discontinuation of breastfeeding, the breasts returned to normal within 2 to 3 weeks.[8] The contraceptive probably caused the breast enlargement.

Bilateral breast enlargement occurred in an otherwise normal 3-month-old male infant whose mother began a combination contraceptive containing 100 mcg of ethinyl estradiol for 21 days with the last 6 days also containing 5 mg of norethindrone. The woman stopped the contraception and the gynecomastia disappeared completely in about 4 weeks.[9] The contraceptive possibly caused the breast enlargement.

In a study of women given a combination of 50 mcg of ethinyl estradiol and 250 mcg of levonorgestrel, an infant (sex not stated) developed transient gynecomastia after 3 months of maternal therapy.[5] The contraceptive possibly caused the breast enlargement.

An 18-month old partially breastfed girl developed bilateral breast enlargement 3 months after her mother began taking an oral contraceptive containing ethinyl estradiol 30 mcg and levonorgestrel 150 mcg. Breastfeeding was discontinued and breast enlargement decreased over the next 6 months. The girl was growing and developing normally at 7 years of age.[10] The contraceptive possibly caused the breast enlargement.

A 10-month-old male infant presented after 3 weeks of vomiting, diarrhea and deterioration in nutritional status. Laboratory evaluation found folic acid deficiency and macrocytic anemia which responded well to folic acid. The mother had been taking a combination oral contraceptive (ingredients not specified) for 3 months. The authors attributed the folic acid deficiency to maternal contraceptive use.[11] The contraceptive possibly caused the folate deficiency.

Forty-eight children (20 boys and 28 girls) whose mothers used a combination oral contraceptive containing 50 mcg of ethinyl estradiol during lactation beginning 2 months postpartum were compared to age- and sex-matched control children whose mothers breastfed, but took no contraceptive. Using several different sources of health records, no differences in the height or weight, illnesses, or intellectual development of the groups at several time points were found up to 8 years of age.[12]

### Effects on Lactation and Breastmilk

High-dose estrogens, alone or in combination with an androgen, were formerly used to suppress lactation in women who did not wish to breastfeed.[13] Combination oral contraceptives containing mestranol 100 mcg daily has also been used as a method for decreasing postpartum breast engorgement in women who did not breastfeed.[14,15] In a randomized, double-blind study, 2 tablets twice daily for 5 days of a combination oral contraceptive containing 50 mcg of ethinyl estradiol had similar efficacy to bromocriptine (dosage not stated) in suppressing postpartum breast engorgement and lactation.[16]

Changes in milk composition of breastmilk (total and nonprotein nitrogen, alpha-lactalbumin, lactoferrin, and albumin) have been observed in women taking various combination contraceptives containing 30 to 50 mcg of ethinyl estradiol and levonorgestrel 150 to 250 mcg or megestrol acetate 4 mg. However, the changes were generally within the normal range of values for healthy women.[17] Similar results were reported by another group with similar combined contraceptives.[18] Another study found no clinically important changes in the composition in the milk of mothers taking a combination contraceptive containing 150 mcg of levonorgestrel and 30 mcg of ethinyl estradiol starting at 6 weeks postpartum. However, milk volume was decreased compared to women who used no hormonal contraception.[19,20]

In a partially randomized study, 25 postpartum women who wanted to breastfeed their infants were given an oral contraceptive containing mestranol 80 mcg and norethindrone 1 mg daily starting 6 weeks postpartum. The duration of lactation and the weight gain of the breastfed infants was reduced among the mothers who received the contraceptive compared to 25 mothers randomized to receive a placebo or who took no tablets.[21]

In a double-blind trial (randomization not stated), mothers were given either placebo (n = 218) or a combination oral contraceptive containing mestranol 50 mcg and norethindrone 1 mg (n = 233) daily from the day after birth to day 8 postpartum. Although there was no difference in the percentage of mothers breastfeeding, women taking the active drug needed to provide supplementary feedings more frequently than placebo-treated patients (12% vs 3.5%). The authors concluded that mothers wishing to breastfeed should not receive this contraceptive.[22]

A nonrandomized study compared 100 women who were 4 to 24 weeks postpartum and were given a combination contraceptive containing mestranol 100 mcg and ethynodiol diacetate 1 mg to women who chose not to use oral contraception. Women who received the contraceptive produced less milk per week than control mothers in the 8 weeks after beginning the contraceptive.[23]

An observational report on 83 women who were given 1 of 9 combination oral contraceptives containing 50 mcg of ethinyl estradiol and 80 to 100 mcg of mestranol starting at 5 days postpartum found that 54% were still breastfeeding at 6 weeks postpartum. This was in comparison to 59% of women who were not taking an oral contraceptive. The authors noted that some mothers who wished to breastfeed had difficulty.[24] Because of the overall low breastfeeding rates, lack of randomization and high loss to follow-up, the results of this study are questionable.

In a randomized trial, 367 women receiving one of several methods of hormonal contraception and 249 women receiving nonhormonal contraception. Women receiving combination contraceptive containing ethinyl estradiol 50 mcg and norethindrone 1 mg beginning 1 month postpartum had a median duration of lactation shorter than control mothers who used no contraception (5.3 vs 4.6 months), but the difference was not statistically significant. Women who used oral contraceptives containing mestranol had a statistically shorter duration of lactation than those using nonhormonal contraception.[25]

One nonrandomized study of 6 women found that daily use of a combination contraceptive containing 10 mcg of ethinyl estradiol and 350 mcg of norethindrone experienced decreases in protein, lipids, calcium and phosphorus compared to 11 women who received nonhormonal contraception. However, these changes were not statistically significant. Milk volume was similar in the two groups.[26]

One group of investigators studied lactational performance in a randomized controlled trial of fully nursing mothers given an oral contraceptive containing levonorgestrel 150 mcg and ethinyl estradiol 30 mcg daily beginning at 30 to 35 days postpartum. Comparison groups were mothers who received no hormonal contraception. Of the mothers evaluated at 91 days postpartum (contraceptive n = 103; placebo n = 188), the contraceptive group had a lower percentage of exclusively breastfeeding mothers (81% vs 92%) and lower average daily infant weight gain during the first month of use and lower absolute weights at 61 and 91 days compared to the control groups.[27] The negative effect of the hormonal contraceptives continued to be seen during postpartum months 4 to 10. Infant weight gain was lower than that of control women who used the lactation amenorrhea method, but not compared to women who used an IUD.[28] The same group studied the same contraceptive in 59 mothers compared to 82 mothers using nonhormonal contraception all of whom were fully breastfeeding at 90 days postpartum. The oral contraceptive was initiated at 90 to 95 days postpartum. At all times from months 6 to 12 postpartum, the percentage of fully breastfed infants in the oral contraceptive group was lower and the percentage of infants receiving supplements was greater, although the average time of complete weaning did not differ between the groups. During the first month of therapy, infants whose mothers were taking the oral contraceptive gained weight at a lower rate than those in the nonhormonal group. However, the absolute weights of the infants were not significantly different at 12 months postpartum.[29] The authors concluded that low-dose combination contraceptives are not a good choice during breastfeeding and that if they are used, they should be instituted as late as possible, and particularly not during the first month postpartum.

In a multicenter, double-blind study, well-nourished women wishing hormonal contraception were randomized to contraceptive containing 30 mcg of ethinyl estradiol and 150 mcg of levonorgestrel (n = 86) or 75 mcg of racemic norgestrel (n = 85) beginning at 6 weeks postpartum. One hundred eleven women who received either no or nonhormonal contraception comprised the control group. Infant growth and maternal milk volume were measured periodically up to 24 weeks postpartum. The decline in milk volume was statistically significantly greater at all time periods from week 6 to 24 for the combined oral contraceptive group (42% vs 17% in the control group and 12% with progestin-only tablets). No differences were seen between groups in average infant growth. The authors concluded that low-dose combined oral contraceptives can be used in well-nourished mothers postpartum, but that they should be warned that their milk volume might be decreased.[30]

A case-control study compared the children of 48 women who used a combination oral contraceptive containing 50 mcg of ethinyl estradiol during lactation beginning at 2 months postpartum. There was a statistically significant difference in the duration of lactation between the contraceptive users and nonusers, 3.7 and 4.6 months, respectively.[12]

A retrospective cohort study compared 371 women who received high-dose estrogen (either 3 mg of diethylstilbestrol or 150 mcg of ethinyl estradiol daily) during adolescence for adult height reduction to 409 women who did not receive estrogen. No difference in breastfeeding duration was found between the two groups, indicating that high-dose estrogen during adolescence has no effect on later breastfeeding.[31]

A prospective, nonrandomized trial compared 4 contraceptives in 10 women each to assess their effect on milk production. One of the following were begun on day 42 postpartum as chosen by the mother: combined ethinyl estradiol 30 mcg plus levonorgestrel 150 mcg (Microvlar), etonogestrel implant (Implanon), levonorgestrel intrauterine system (Myrena), or a copper IUD (Optima). Milk intake was measured using deuterium oxide given to the mother and measured in the infants’ saliva as well as numbers of wet diapers per day. Infants were also weighed and measured to assess growth. No differences in milk intake or infant growth were observed between the methods from days 42 through 63.[32]

A study analyzed data from a prospective cohort study of U.S. women from May 2005 through June 2007. Women were followed from the third trimester of pregnancy throughout the first year postpartum. Data from the subset of women who intended to breastfeed for 3 months or longer postpartum during their third trimester of pregnancy and who were using a contraceptive at 3 months postpartum were analyzed (n = 1349). Women who intended to breastfeed for at least 4 months and were taking an estrogen-containing combined oral contraceptive were only 17% as likely to be breastfeeding (exclusive or nonexclusive) at 4 months as women who used a nonhormonal contraceptive. Women who said they would breastfeed for 3 to 4 months were 34% as likely to be breastfeeding as those using a nonhormonal contraceptive. These rates were much lower than those of women who were taking a progestin-only oral contraceptive who breastfed at a rate similar to those using a nonhormonal contraceptive.[33]

Reduced breastmilk production was reported in two nursing mothers after they began a combination oral contraceptive containing ethinyl estradiol 30 mcg and drospirenone 3 mg (Rosal 28, Evolan Pharma AB, Sweden), one at 15.5 weeks postpartum and the other at 6 weeks postpartum. The latter mother noticed a decline in the milk volume 10 days after the initiation of the contraceptive from 180 mL to 20 mL in a single day. Both infants experienced decreased weight gain. Both mothers stopped their contraceptive and their milk supply returned. Infant weight gain eventually normalized in both infants.[34]

### Alternate Drugs to Consider

Etonogestrel, Intrauterine Copper Contraceptive, Oral Levonorgestrel, Intrauterine Levonorgestrel, Levonorgestrel Implant, Medroxyprogesterone Acetate, Progesterone

### References

1 Nguyen AT, Curtis KM, Tepper NK, et al. U.S. Medical Eligibility Criteria for Contraceptive Use, 2024. MMWR Recomm Rep 2024;73:1-126 39106314
2 World Health Organization. Medical Eligibility Criteria For Contraceptive Use: Fifth Ed. 2015.https://www.who.int/publications/i/item/9789241549158
3 Moses-Kolko EL, Berga SL, Kalro B, et al. Transdermal estradiol for postpartum depression: A promising treatment option. Clin Obstet Gynecol 2009;52:516-29 19661765
4 Johnson HM, Eglash A, Mitchell KB, et al. ABM Clinical Protocol #32: Management of hyperlactation. Breastfeed Med 2020;15:129-34 32031417
5 Nilsson S, Nygren KG, Johansson ED. Ethinyl estradiol in human milk and plasma after oral administration. Contraception 1978;17:131-9 630883
6 Betrabet SS, Shikary ZK, Toddywalla VS, et al. ICMR Task Force Study on hormonal contraception. Biological activity of ethinyl estradiol present in the breast milk. Contraception 1986;34:169-75 3780231
7 Segev L, Ben Zimra A, Weitzman GA, et al. Ethinylestradiol transfer into breast milk of women using low-dose combined hormonal contraception is negligible. Open Access J Contracept 2025;16:189-97 41399541
8 Curtis EM. Oral-contraceptive feminization of a normal male infant. Obstet Gynecol 1964;23:295-6 14117345
9 Marriq P, Oddo G. Gynecomastia in the newborn induced by maternal milk? An unusual complication of oral contraceptives. Nouv Presse Med 1974;3:2579 4467130
10 Madhavapeddi R, Ramachandran P. Side effects of oral contraceptive use in lactating women - enlargement of breast in a breast-fed child. Contraception 1985;32:437-43 4085247
11 Mandel H, Berant M. Oral contraceptives and breastfeeding: Haematological effects on the infant. Arch Dis Child 1985;60:971-2 4062349
12 Nilsson S, Mellbin T, Hofvander Y, et al. Long-term follow-up of children breast-fed by mothers using oral contraceptives. Contraception 1986;34:443-57 3816229
13 Louviere RL, Upton RT. Evaluation of Deladumone OB in the suppression of postpartum lactation. Am J Obstet Gynecol 1975;121:641-2 1090174
14 Booker DE, Pahl IR. Control of postpartum breast engorgement with oral contraceptives. Am J Obstet Gynecol 1967;98:1099-101 4951893
15 Booker DE, Pahl IR, Forbes DA. Control of postpartum breast engorgement with oral contraceptives. II. Am J Obstet Gynecol 1970;108:240-2 4952576
16 Piya-Anant M, Worapitaksanond S, Sittichai K, et al. The combined oral contraceptive pill versus bromocriptine to suppress lactation in puerperium: A randomized double blind study. J Med Assoc Thai 2004;87:670-3 15279347
17 Lönnerdal B, Forsum E, Hambraeus L. Effect of oral contraceptives on composition and volume of breast milk. Am J Clin Nutr 1980;33:816-24 7361700
18 Costa TH, Dorea JG. Concentration of fat, protein, lactose and energy in milk of mothers using hormonal contraceptives. Ann Trop Paediatr 1992;12:203-9 1381897
19 Sas M, Gellen JJ, Dusitsin N, et al. An investigation on the influence of steroidal contraceptives on milk lipid and fatty acids in Hungary and Thailand. WHO Special Programme of Research, Development and Research Training in Human Reproduction. Task Force on oral contraceptives. Contraception 1986;33:159-78 2938886
20 Anon. Effects of hormonal contraceptives on breast milk composition and infant growth. World Health Organization (WHO) Task Force on Oral Contraceptives. Stud Fam Plann 1988;19:361-9 2906764
21 Miller GH, Hughes LR. Lactation and genital involution effects of a new low-dose oral contraceptive on breast-feeding mothers and their infants. Obstet Gynecol 1970;35:44-50 5409834
22 Kaern T. Effect of an oral contraceptive immediately post partum on initiation of lactation. Br Med J 1967;3:644-5 6038336
23 Kora SJ. Effect of oral contraceptives on lactation. Fertil Steril 1969;20:419-23 5814068
24 Gambrell RD, Jr. Immediate postpartum oral contraception. Obstet Gynecol 1970;36:101-6 5463543
25 Guiloff E, Ibarra-Polo A, Zanartu J, et al. Effect of contraception on lactation. Am J Obstet Gynecol 1974;118:42-5 4128673
26 Toddywalla VS, Joshi L, Virkar K. Effect of contraceptive steroids on human lactation. Am J Obstet Gynecol 1977;127:245-9 835620
27 Díaz S, Peralta O, Juez G, et al. Fertility regulation in nursing women: III. Short-term influence of a low-dose combined oral contraceptive upon lactation and infant growth. Contraception 1983;27:1-11 6404595
28 Croxatto HB, Díaz S, Peralta O, et al. Fertility regulation in nursing women: IV. Long-term influence of a low-dose combined oral contraceptive initiated at day 30 postpartum upon lactation and infant growth. Contraception 1983;27:13-25 6404596
29 Peralta O, Díaz S, Juez G, et al. Fertility regulation in nursing women: V. Long-term influence of a low-dose combined oral contraceptive initiated at day 90 postpartum on lactation and infant growth. Contraception 1983;27:27-38 6404597
30 Tankeyoon M, Dusitsin N, Chalapati S, et al. Effects of hormonal contraceptives on milk volume and infant growth. WHO Special Programme of Research, Development and Research Training in Human Reproduction Task force on oral contraceptives. Contraception 1984;30:505-22 6241559
31 Jordan HL, Bruinsma FJ, Thomson RJ, et al. Adolescent exposure to high-dose estrogen and subsequent effects on lactation. Reprod Toxicol 2007;24:397-402 17531440
32 Bahamondes L, Bahamondes MV, Modesto W, et al. Effect of hormonal contraceptives during breastfeeding on infant's milk ingestion and growth. Fertil Steril 2013;100:445-50 23623474
33 Goulding AN, Wouk K, Stuebe AM. Contraception and breastfeeding at 4 months postpartum among women intending to breastfeed. Breastfeed Med 2018;13:75-80 29091478
34 Karlsson Lind L, Dreher Sköld P, Wallström M, et al. Two cases of reduced mother's milk production during use of combined oral contraceptives. J Hum Lact 2025:8903344251357624 40754931

## Substance Identification

### Substance Name

Contraceptives, Oral, Combined

### Drug Class

Breast Feeding

Lactation

Milk, Human

Contraceptive Agents, Female

Contraceptives, Oral, Synthetic